# Ketoconazole

CASRN: 65277-42-1

## Drug Levels and Effects

### Summary of Use during Lactation

Because there is little published experience with ketoconazole or levoketoconazole during breastfeeding and its potential liver enzyme inhibition and liver toxicity, other agents are preferred. The manufacturers recommend that mothers taking ketoconazole or levoketoconazole avoid breastfeeding during treatment and for 1 day after the last dose.

Use of ketoconazole shampoo or topical use on the skin by the mother poses little to no risk to the breastfed infant.[1,2] However, topical use on the breast or nipples should be avoided in nursing mothers because of possible oral ingestion by the infant and the availability of safer alternatives. Only water-miscible cream or gel products should be applied to the breast because ointments may expose the infant to high levels of mineral paraffins via licking.[3]

### Drug Levels

Maternal Levels. A mother who was 1 month postpartum took ketoconazole 200 mg orally for 10 days. A peak ketoconazole milk level of 220 mcg/L occurred 3.25 hours after the dose and the average milk level was 68 mcg/L. The authors calculated that an exclusively breastfed infant would ingest an average of 0.01 mg/kg daily or about 0.4% of the maternal weight-adjusted dosage and a maximum of 0.033 mg/kg daily or about 1.4% of the maternal weight-adjusted dosage.[4]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A mother taking ketoconazole 200 mg orally for 10 days noticed no adverse effects in her breastfed 1-month-old infant.[4]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Clotrimazole, Fluconazole, Miconazole, Nystatin

### References

1 Mactal-Haaf C, Hoffman M, Kuchta A. (2001). Use of anti-infective agents during lactation, Part 3: Antivirals, antifungals, and urinary antiseptics. J Hum Lact.
2 Leachman SA, Reed BR. (2006). The use of dermatologic drugs in pregnancy and lactation. Dermatol Clin.
3 Noti A, Grob K, Biedermann M, et al. (2003). Exposure of babies to C(15)-C(45) mineral paraffins from human milk and breast salves. Regul Toxicol Pharmacol.
4 Moretti ME, Ito S, Koren G. (1995). Disposition of maternal ketoconazole in breast milk. Am J Obstet Gynecol.

## Substance Identification

### Substance Name

Ketoconazole

### CAS Registry Number

65277-42-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antifungal Agents

Dermatologic Agents

Enzyme Inhibitors